# Natalizumab

CASRN: 189261-10-7

## Drug Levels and Effects

### Summary of Use during Lactation

Measurable, but low, amounts of natalizumab are excreted into breastmilk in some women. The peak level in breastmilk often occurs in the first week after the dose, but might be as long as 6 months with repeated doses. Limited information indicates that the drug is not measurable in the serum of breastfed infants. Most expert guidelines consider breastfeeding with natalizumab to be acceptable.[1-7] Waiting for at least 2 weeks postpartum to resume therapy may minimize transfer to the infant.[8]

### Drug Levels

Maternal Levels. A woman was started on natalizumab 300 mg intravenously while nursing her 11.5-month-old infant. Multiple milk levels were obtained almost daily over the 50 days after she received a dose on day 1 and another on day 29. Natalizumab was undetectable (<250 mcg/L) in breastmilk until day 14 when a concentration of 333 mcg/L was measured. A peak level of 1.01 mg/L was detected on day 20. On day 29, the natalizumab milk level was 491 mcg/L when the second dose was given. Milk levels increased to a maximum of 2.83 mg/L on day 50 when breastmilk collection ceased.[9]

Natalizumab was detected in the breastmilk in one of two mothers of newborn infants at a concentration of 1.89 mg/L just prior to a dose. The previous maternal dose had been given during pregnancy, but the maternal dose and time since the previous dose were not reported in the abstract. The other mother had no detectable natalizumab in breastmilk.[10]

Four women who were receiving natalizumab for multiple sclerosis donated breastmilk samples at various times after infusion of 300 mg of the drug up to 5.5 months postpartum. Concentrations of free natalizumab in breastmilk ranged from 2 to 412 mcg/L. One mother had no detectable natalizumab at any time and another had only trivial amounts at 6 time points. Variability in milk levels was considerable but inversely correlated with the time since the infusion. Regression indicated that on average, natalizumab was cleared from milk at about 35 days after a dose, although it was detectable at very low levels beyond this time in 2 samples.[11]

In a multi-center study of women with inflammatory bowel disease in pregnancy (the PIANO registry), 2 women receiving natalizumab provided milk samples at 1, 12, 24, and 48 hours after drug administration. One woman had natalizumab in breastmilk at 12 hours and 24 hours in concentrations of 0.26 and 0.46 mg/L, respectively.[2]

Three mothers provided milk samples at different time points during natalizumab therapy. Two provided multiple samples after their first dose postpartum. Peak levels were about 120 and 140 mcg/L and occurred 4 to 7 days after the dose (maternal dosage not provided). Milk natalizumab levels were undetectable on days 26 and 51 after the dose, respectively. Another mother provided milk samples at 13 to 15 days after her fourth dose postpartum. Levels were 40 to 50 mcg/L.[4]

Eleven women with relapsing-remitting multiple sclerosis were taking natalizumab during breastfeeding. All received 300 mg every 4 weeks during pregnancy, but one switched to every 6 weeks starting at week 30 of pregnancy. Eight of the 11 women provided at least 9 serial breastmilk samples after the first up to tenth (range 2 to 10 infusions) maintenance infusion after delivery. Samples were collected immediately before infusion, one day and several days after infusion. The other three patients provided 1, 3 or 4 breastmilk samples. A total of 178 breastmilk samples were obtained, with 8 patients donating 9 to 51 samples. The mean peak concentration of the 8 women was 0.126 mg/L and usually occurred in the first 8 days after the infusion. Their mean average concentration was 0.05 mg/L. No increases in milk natalizumab concentrations over time were seen. The average infant dosage was calculated to be 8 mcg/kg daily.[12]

Milk samples were collected from a woman with relapsing-remitting multiple sclerosis who had been treated with natalizumab for 14 years. Natalizumab was stopped 6 weeks before delivery and resumed 4 weeks postpartum, with an infusion every 6 weeks thereafter at an unspecified dosage. Eighteen milk samples were collected: before the first post-partum infusion and then weekly over the following 125 days with an average 8-day interval between samples. Free natalizumab was detectable in all the milk samples after the first dose, with a peak natalizumab concentration of 878 mcg/L after the first dose. The peak milk level was reached 1 week after each infusion. The mean milk concentration was 173.3 mcg/L.[13]

Infant Levels. Two nursing mothers who were taking natalizumab postpartum provided infant blood samples for analysis. One infant had a blood level taken 13 days after the mother’s first dose postpartum and the second had two blood samples taken at 13 and 51 days after the maternal dose. Natalizumab was undetectable in all samples (lower limit of assay, maternal dosage and extent of breastfeeding not provided).[4]

### Effects in Breastfed Infants

In a multi-center study of women with inflammatory bowel disease in pregnancy (the PIANO registry), 8 women received natalizumab while breastfeeding their infants. Among those who received natalizumab or another biologic agent while breastfeeding, infant growth, development or infection rate was no different from infants whose mothers received no treatment. An additional 68 women received a biologic agent plus a thiopurine. Infant outcomes were similar in this group.[2]

A retrospective cohort study from the German Multiple Sclerosis and Pregnancy Registry database identified 17 mothers who received natalizumab during breastfeeding. The first natalizumab infusion was administered after a median of 14 days (range 1-124 days) postpartum. Thirteen of the infants had also been exposed to natalizumab during the third trimester of pregnancy. More infants with third-trimester natalizumab exposure had a low birthweight and were hospitalized than unexposed children. Infants were followed up for 1 year. Among the infants exposed only during breastfeeding, the mothers of 2 received the drug every 4 weeks and 2 received it every 6 weeks postpartum. They were breastfed for between 0.6 and 9.2 months. One of the 4 infants was a preterm infant who developed a respiratory syncytial virus infection, and the others had no infections. Two of the infants had normal blood counts postpartum and the two others were not tested.[4]

One hundred eighty-three patients with multiple sclerosis or a related condition who received an anti-inflammatory monoclonal antibody were compared to 183 control patients. No differences were found in the annual rates of hospitalization, annual antibiotic use, or development of their breastfed (extent not stated) infants. Of the 183 patients, 125 received natalizumab.[14]

Ten women with multiple sclerosis received natalizumab during pregnancy through the second trimester and then postpartum. They breastfed (extent not stated) their infants starting after the colostral phase, within 4 weeks postpartum. Children were followed for 1 to 5 years. All had normal growth, neuromotor, and language development. No infections, hematological disorders or hospitalizations were recorded during or after breastfeeding. All received scheduled vaccinations without complications.[15]

A follow-up study of 10 infants who were breastfed during maternal natalizumab therapy for multiple sclerosis found no development delays over with observation periods up to 10 years.[16] The amount of breastfeeding and other details were not provided in the abstract.

A prospective single-center cohort study of infants, born in 2013 to 2022 were followed up at 6 to 36 months postpartum via telephone interviews. One hundred eighty-three infants who were breastfed during maternal monoclonal antibody therapy for multiple sclerosis or neuromyelitis optica spectrum disorder were matched to infants of disease-modifying therapy-naïve mothers. No differences were found in developmental delay, systemic antibiotic use, severe infections, or hospitalizations. Of the 183 infants, 125 were exposed to natalizumab.[17]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Inflammatory Bowel Disease) Budesonide, Infliximab, Mesalamine, Prednisone; (Multiple Sclerosis) Glatiramer, Immune Globulin, Interferon beta

### References

1 Matro R, Martin CF, Wolf D, . Exposure concentrations of infants breastfed by women receiving biologic therapies for inflammatory bowel diseases and effects of breastfeeding on infections and development. Gastroenterology 2018;155:696-704.29857090
2 Mahadevan U, Robinson C, Bernasko N, . Inflammatory bowel disease in pregnancy clinical care pathway: A report from the American Gastroenterological Association IBD Parenthood Project Working Group. Gastroenterology 2019;156:1508-24.30658060
3 Dobson R, Dassan P, Roberts M, . UK consensus on pregnancy in multiple sclerosis: ‘Association of British Neurologists’ guidelines. Pract Neurol 2019;19:106-14.30612100
4 Ciplea AI, Langer-Gould A, de Vries, A, . Monoclonal antibody treatment during pregnancy and/or lactation in women with MS or neuromyelitis optica spectrum disorder. Neurol Neuroimmunol Neuroinflamm 2020;7:e723.32327455
5 Shipley J, Beharry J, Yeh W, . Consensus recommendations on multiple sclerosis management in Australia and New Zealand: Part 2. Med J Aust 2025;222:365-71.39923190
6 Mahadevan U, Seow CH, Barnes EL, . Global consensus statement on the management of pregnancy in inflammatory bowel disease. Clin Gastroenterol Hepatol 2025;23 (11S):S1-S60.40874901
7 Mullan G, Ford HL, Blackall P, . UK consensus on pregnancy in multiple sclerosis: An update to ‘Association of British Neurologists’ guidance. Mult Scler 2026;32:885-96.42397849
8 Krysko KM, Dobson R, Alroughani R, . Family planning considerations in people with multiple sclerosis. Lancet Neurol 2023;22:350-66.36931808
9 Baker TE, Cooper SD, Kessler L, . Transfer of natalizumab into breast milk in a mother with multiple sclerosis. J Hum Lact 2015;31:233-6.25586712
10 Hainke U, Sehr T, Eisele JC, . Natalizumab: Passage into breast milk and neonatal blood. Mult Scler 2015;23:690. doi:10.1177/1352458515602642
11 Proschmann U, Thomas K, Thiel S, . Natalizumab during pregnancy and lactation. Mult Scler 2018;24:1627-34.28857686
12 Proschmann U, Haase R, Inojosa H, . Drug and neurofilament levels in serum and breastmilk of women with multiple sclerosis exposed to natalizumab during pregnancy and lactation. Front Immunol 2021;12:715195.34512637
13 Callegari I, Schneider M, Aebischer V, . Natalizumab in cerebrospinal fluid and breastmilk of patients with multiple sclerosis. Ther Adv Neurol Disord 2023;16:17562864221150040.36741352
14 Conti MG, Terreri S, Terrin G, . Severe acute respiratory syndrome Coronavirus 2 infection versus vaccination in pregnancy: Implications for maternal and infant immunity. Clin Infect Dis 2022;75 (Suppl 1):S37-S45.35535796
15 Carrozzo G, Pinardi F, Lugaresi A. Long-term safety evaluation of natalizumab during pregnancy and lactation in patients with multiple sclerosis. Neurol Sci 2025;46:3797-802.40332701
16 Camilli F, Carrozzo G, Bandini A, . Maternal and neonatal outcomes of natalizumab and anti-CD20 monoclonal antibody exposure during pregnancy and lactation in multiple sclerosis. Mult Scler J 2025;31 (3 Suppl):1363-4. doi:10.1177/13524585251370543
17 Witt L, Friedmann N, Haben S, . Safety of breastfeeding under monoclonal antibodies in the offspring of mothers with multiple sclerosis or neuromyelitis optica spectrum disorder. J Neurol Neurosurg Psychiatry 2026;97:522-31.41760394

## Substance Identification

### Substance Name

Natalizumab

### CAS Registry Number

189261-10-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal

Anti-Inflammatory Agents